# Sparsentan

CASRN: 254740-64-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of sparsentan during breastfeeding. The manufacturer recommends that breastfeeding be discontinued during sparsentan therapy because of potential adverse effects in the infant such as hypotension.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Sparsentan

### CAS Registry Number

254740-64-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Endothelin Receptor Antagonists